# Lamotrigine

CASRN: 84057-84-1

## Drug Levels and Effects

### Summary of Use during Lactation

Breastfeeding during lamotrigine monotherapy does not appear to adversely affect infant growth or development in most infants. Breastfed infants had higher IQs and enhanced verbal abilities than nonbreastfed infants at 6 years of age in one study.[1] Occasional adverse reactions have been reported in infants who receive lamotrigine in milk. Breastfed infants should be carefully monitored for side effects such as apnea, rash, drowsiness or poor sucking, including measurement of serum levels to rule out toxicity if there is a concern. Monitoring of the platelet count and liver function and infant serum concentrations before and after increases in maternal lamotrigine dosage might also be advisable. If an infant rash occurs, breastfeeding should be discontinued until the cause can be established. Infants of mothers taking 150 mg daily or less can undergo less extensive monitoring because they are unlikely to have measurable serum lamotrigine concentrations. If the mother requires lamotrigine, it is not a reason to discontinue breastfeeding. It is important to monitor maternal serum lamotrigine concentration after delivery and adjust the dosage accordingly, because maternal serum levels often increase after delivery. A computer simulation indicated that reducing the dose by 25% weekly for 3 weeks postpartum enabled a stable return to pre-pregnancy exposure. When the postpartum lamotrigine dose exceeded 300 mg daily, closer attention was needed for neonates aged 0 to 4 weeks of age.[2]

### Drug Levels

In published reports of anticonvulsant use during breastfeeding, most women were taking a combination of anticonvulsants. Some other anticonvulsants (e.g., phenytoin, carbamazepine) stimulate the metabolism of other drugs including anticonvulsants, whereas others (e.g., valproic acid) inhibit the metabolism of other drugs. Therefore, the relationship of the maternal dosage to the concentration in breastmilk can be quite variable, making calculation of the weight-adjusted percentage of maternal dosage less meaningful than for other drugs in this database.

Maternal Levels. An epileptic woman took oral lamotrigine 300 mg daily throughout pregnancy and postpartum. After 6 weeks postpartum, the dosage was reduced to 200 mg daily. Breastmilk lamotrigine levels (time with respect to the doses not stated) on a dose of 300 mg daily ranged from 2.4 to 6.5 mg/L. After reducing the maternal dosage to 200 mg daily, the milk levels were 1.95 and 1.26 mg/L at days 64 and 92 postpartum, respectively.[3]

A woman with epilepsy was taking lamotrigine at a dosage of 300 mg daily in the last half of pregnancy and postpartum. At 2 weeks postpartum, breastmilk samples taken before the morning dose, before and after nursing, were 5.6 and 5.7 mg/L, respectively.[4]

Thirty-four women with 35 births had breastmilk lamotrigine levels monitored. Specific dosages and milk levels were not reported in the abstract, but the authors stated that they calculated that some of the infants received an mg/kg dosage that would be expected to produce therapeutic serum levels. However, infant serum levels were not reported.[5]

Nine mothers with epilepsy mothers with 10 pregnancies taking lamotrigine in daily dosages averaging 411 mg daily (range 100 to 800 mg daily) had their breastmilk lamotrigine levels monitored between days 13 and 18 postpartum before and after nursing. (One of the mothers had her first of 2 pregnancies reported previously in reference [2]) Three of the women were also taking other anticonvulsants that induce lamotrigine metabolism; one was taking valproic acid that inhibits lamotrigine metabolism. The average prenursing breastmilk level was 7.4 mg/L (range 1 to 8.2 mg/L), 11.8 hours after the previous dose. The average postnursing level was 5.6 mg/L (range 1 to 8.2 mg/L); one mother had taken a dose during nursing. The authors estimated that these exclusively breastfed infants would receive between 0.2 and 1 mg/kg daily or about 9% (range 2 to 20%) of the maternal weight-adjusted dosage.[6,7]

Six nursing mothers who were taking lamotrigine in an average dosage of 6.3 mg/kg daily (range 1.75 to 12.5 mg/kg daily)collected milk over 1 to 2 dosage intervals. The mean infant daily dosage of lamotrigine in breastmilk was 0.45 mg/kg daily (range 0.1 to 0.75 mg/kg daily) which was 7.6% (range 5.7 to 9.9%) of the maternal weight-adjusted dosage.[8]

A hospital laboratory evaluated all requests for lamotrigine concentration measurements. Mothers were taking between 50 to 500 mg of lamotrigine daily in the postpartum period. Milk concentrations ranged from 0.3 to 10.3 mg/L.[9]

Twenty-four nursing mothers taking lamotrigine had serum and breastmilk concentrations measured on several occasions. The average lamotrigine dosage was 387 mg daily (range 50 to 800 mg daily) or 5.93 mg/kg daily (range 0.99 to 14.34 mg/kg daily). The average breastmilk concentration of all samples was 3.4 mg/L (range 0.5 to 11.8 mg/L). The authors estimated that an exclusively breastfed infant would receive an average dosage of 0.51 mg/kg daily which was equivalent to 9.2% (range 3.1 to 21.1%) of the maternal weight-adjusted maternal dosage. Among 16 women who donated multiple serial milk samples, the peak milk concentrations occurred about 3 hours after the dose and averaged 2.3 times the average minimum milk concentration.[10]

Four women who were taking lamotrigine during pregnancy and postpartum had their milk analyzed for lamotrigine twice between 1 to 12 weeks postpartum. Maternal dosages ranged from 250 to 900 mg daily and milk concentrations ranged from 2.8 to 8 mg/L.[11]

A mother was taking 875 mg of lamotrigine daily at term and her dosage was slowly reduced by 25 mg daily at weekly intervals beginning 2 weeks postpartum. On day 22 postpartum with a dose of 600 mg daily, her milk lamotrigine level was 7.68 mg/L 13 hours after a dose and on day 25, it was 10.06 mg/L 3.5 hours after the same dose. From days 28 to 64 postpartum on doses of 525 to 575 mg daily, milk samples contained 7.02 to 8.71 mg/L of lamotrigine 12 to 14 hours after a dose. The authors estimated that the infant's daily dosage on day 22 was 1.15 mg/kg, equating to 13% of the maternal weight-adjusted dosage.[12]

Nine women taking lamotrigine for epilepsy had colostrum or milk samples taken at random times between 30 minutes and 3 days postpartum. The average maternal dose was 311 mg daily (range 50 to 500 mg daily) and the average milk level was 3 mg/L (range 1.6 to 8.7 mg/L). Milk levels correlated with maternal serum levels, but not with maternal dosage.[13]

Thirty-nine nursing mothers who were taking lamotrigine alone or with drugs that induce (n = 3) or inhibit (n = 2) lamotrigine’s metabolism had both serum and breastmilk samples taken between days 6 and 33 postpartum over the period of 2002 to 2017. Most samples were obtained before the first morning dose. The mean breastmilk lamotrigine concentration was 2.8 mg/L (range <0.66 to 9.1 mg/L) Milk concentrations were highly correlated with maternal serum concentrations.[14]

Five samples of breastmilk were obtained from women after taking a 100 mg dose of lamotrigine. Concentrations between 8 and 12 hours after a dose were in the range of 3.9 to 5.7 mcg/L.[15]

Seventeen nursing mothers who were taking lamotrigine therapeutically in doses ranging from 1.6 to 7.6 mg/kg daily donated a milk sample before the morning lamotrigine dose, and again at 1, 3, 6, 9, and 12 hours after the dose. The highest milk lamotrigine concentrations occurred at 2 to 4 hours after the dose, with considerable interindividual variability. The average milk level was 2.75 mg/L (range 0.65 to 7.8 mg/L). The estimated infant daily dose of lamotrigine was 0.40 mg/kg (range 0.21 to 0.73 mg/kg) for the 13 infants who were fully breastfed. The relative infant dosages of those 13 infants averaged 11.6% (range 5 to 31%). The authors found no significant correlation between the maternal weight-adjusted daily dosage and breastmilk trough or AUC values. However, there was high correlation between maternal trough serum concentrations and trough breastmilk concentrations and breastmilk AUC values.[16]

One hundred thirty women taking lamotrigine monotherapy during pregnancy and postpartum had measurements of lamotrigine in colostrum taken between days 2 and 5 postpartum usually before the morning dose for routine monitoring. Colostrum lamotrigine levels averaged 1.4 mg/L (range 0.3 to 10.3) mg/L, but averaged 1.6 mg/L in eight women taking a concomitant enzyme inducer and 4.9 mg/L in nine mothers taking concomitant valproic acid.[17]

Five nursing mothers were taking lamotrigine in dosages from 50 to 150 mg twice daily. The authors calculated absolute infant dosage was 0.29 mg/kg daily, with a dosage of 200 mg daily in a 70 kg woman. This dosage resulted in a mean RID of 10.1% (range 8.7 to 15.7%).[18]

A PBPK model was developed for lamotrigine during pregnancy, the postpartum period and lactation that reproduced reported concentrations well. The authors concluded that postpartum, reducing the dose by 25% weekly for 3 weeks enabled a stable return to pre-pregnancy exposure. When the postpartum lamotrigine dose exceeded 300 mg daily, closer attention was needed for neonates aged 0 to 4 weeks of age.[2]

Infant Levels. An infant was exclusively breastfed from day 2 of age during maternal treatment with lamotrigine 300 mg daily. Infant total serum level at 2 days of age was 2.8 mg/L (free drug 1.2 mg/L), reflecting transplacental passage. Serum levels taken periodically 2 to 3 hours after the morning dose and 1 to 2 hours after breastfeeding ranged from 1.7 to 2.7 mg/L (free drug 0.73 to 1 mg/L). After maternal dosage reduction to 200 mg daily and 50% formula supplementation, total serum levels on days 64 and 92 dropped to 1.54 and 0.75 mg/L (free drug 0.53 and 0.24 mg/L), respectively. Infant serum levels were undetectable (total <0.2 mg/L; free <0.1 mg/L) on days 144 and 145 with only one breastfeeding daily.[3]

The 2-week old breastfed infant of a mother taking lamotrigine 300 mg daily had a level of 1.4 mg/L before the mother's morning dose.[4]

The plasma levels of 10 breastfed infants of 9 mothers taking lamotrigine during pregnancy and postpartum were monitored after birth. Most were breastfed from day 1 or 2 of age. Their transplacentally acquired plasma levels, which were similar to maternal plasma levels at birth, generally dropped slightly over the first 72 hours of life. Infant plasma levels 2 to 3 weeks postpartum averaged 1.7 mg/L (range 0.5 to 3.3 mg/L) before nursing about 11.8 hours after the previous maternal dose and 1.5 mg/L (range <0.5 to 2.5 mg/L) after nursing. Infant plasma levels averaged 30% (range 23 to 50%) of their mothers' plasma levels at that time.[6,7]

One breastfed infant whose mother was taking lamotrigine had a serum concentration of 1.7 mg/L 10 days after delivery. This was 30.4% of the maternal serum concentration.[19]

Four infants of mothers taking lamotrigine monotherapy during pregnancy and lactation for partial seizures had their plasma levels monitored on day 10 of age (sampling time with respect to dose or nursing not reported). Maternal dosages were 200, 400, 750, and 800 mg and the respective infants’ serum levels were <1, 1.8, 2, and 1.3 mg/L. Repeat levels in 2 infants at 2 months of age were 1.7 and 1.9 mg/L (previously 1.8 and 1.3 mg/L, respectively). Infant plasma levels ranged from 0 to 43% of maternal plasma levels at 10 days of age and 20 and 23% of maternal levels at 2 months when they were partially breastfed, each receiving formula for 2 or 3 feedings daily.[20]

Six infants with a median age of 4.1 months (range 0.1 to 5.1 months) were breastfed during maternal use of lamotrigine in an average dosage of 6.3 mg/kg daily. Five were exclusively breastfed and one was about 50% breastfed. Single serum levels taken at various times after the maternal dose averaged 0.6 (range 0.3 to 0.9 mg/L) which averaged 18% (range 3 to 33%) of maternal serum levels.[8]

A hospital laboratory evaluated all requests for lamotrigine concentration measurements. Mothers were taking between 50 to 500 mg of lamotrigine daily. Infants’ serum concentrations averaged 88% of their mothers' serum concentrations at delivery and averaged 45 to 55% of their mothers' serum concentrations at 3, 7, 14 and 30 days after delivery, although the percentage of infants who were breastfed was not stated. Infants who were breastfed (extent not stated) had serum concentrations ranging from <0.1 to 12.7 mg/L.[9]

Simultaneous infant and maternal serum lamotrigine concentrations were obtained from 12 mother-infant pairs during maternal use of lamotrigine. Total infant serum concentrations of lamotrigine averaged 18.3% of maternal serum concentrations, but unbound infant serum concentrations averaged 30.9% of maternal levels, probably because the drug was less bound in the infants' serum. In 4 mother-infant pairs who had simultaneous serum sampling at delivery and again during the first 4 weeks postpartum, infant/maternal serum concentration ratios averaged 12.2 (total) and 6.2 (unbound) times higher at delivery than at the second sampling. These decreases indicate that exposure to lamotrigine during breastfeeding is much less than exposure during pregnancy.[10]

The Berlin Teratogen Information Service evaluated 29 infants whose mothers were taking lamotrigine. Serum levels were measured under steady-state conditions more than 10 days after birth (average 6.4 weeks). The mean serum level was 1.8 mg/L (range <0.4 to 6.6 mg/L). Eighteen babies (62%) had lamotrigine serum levels within therapeutic range of 1 to 10 mg/L.[21]

Four breastfed infants (extent not stated), whose mothers were taking lamotrigine in dosages ranging from 250 to 900 mg daily, had serum lamotrigine concentrations measured twice after breastfeeding between 1 and 12 weeks postpartum. The median serum concentration in the infants was 2.2 mg/L (range 1.7 to 3.3 mg/L), which was 26% of the median maternal serum concentrations.[11]

An infant was fully breastfed by a mother taking lamotrigine during pregnancy and postpartum. The infant had a serum concentration of 7.7 mg/L at 12 hours of life and 5.8 mg/L on day 3 of life while his mother was taking 875 mg daily of lamotrigine. On day 16, 4 hours after the maternal dose and 3 hours after breastfeeding, the infant's serum concentration was 4.9 mg/L with a maternal dose of 850 mg daily. Breastfeeding was terminated on day 17 because of an severe apneic episode in the infant; on day 22, the infant's serum concentration was 1.3 mg/L and on day 25 it was 0.5 mg/L.[12]

A computer simulation of 300 cases in which the mother was receiving 200 mg of lamotrigine daily estimated that a fully breastfed infant would receive an average of 2 mg of lamotrigine daily and develop average serum concentration of 1 mg/L.[22]

Three breastfed preterm infants whose mothers were taking lamotrigine 200 mg daily had serum lamotrigine levels measured. One infant whose mother was taking no other drugs, had undetectable serum lamotrigine. The other two infants were twins whose mother was taking other unspecified medications for bipolar disorder. They reportedly had serum levels "within the therapeutic range". Whether the infants were exposed prenatally was not stated.[23]

Four mothers treated with lamotrigine for bipolar disorder in dosages of 100 to 300 mg daily fully breastfed their infants. Infant and maternal serum samples were obtained between 1.5 and 5 weeks postpartum. The infant serum levels averaged 32.5% (range 18 to 46%) of the maternal serum levels.[24]

A woman was taking lamotrigine 120 mg daily for epilepsy during pregnancy, which was increased to 200 mg daily during the third trimester. The dosage was reduced to 150 mg daily postpartum. Her 40-day-old infant developed anemia, possibly associated with lamotrigine and had a serum lamotrigine concentration of 1.4 mg/L.[25]

Thirty-eight infants breastfed by mothers who were taking lamotrigine alone or with drugs that induce (n = 4) or inhibit (n = 4) lamotrigine’s metabolism had both serum samples taken between days 6 and 33 postpartum over the period of 2002 to 2017. Most samples were obtained before the first morning dose. The mean infant serum lamotrigine concentration was 1.6 mg/L (range <0.66 to 3.8 mg/L) Serum concentrations were highly correlated with maternal serum concentrations. The mean ratio of infant to maternal serum concentrations was 0.34. The mean ratio between infant serum concentration and maternal milk concentration was 0.94.[14]

In a multicenter study of nursing mother-infant pairs, 70 infants had blood samples taken at about the same time as maternal blood samples. Sixty-three of the infants had blood levels of lamotrigine above the lower limit of quantification (0.1 mg/L). The authors estimated the average infant lamotrigine serum concentration to be 1.6 mg/L (range 0.05 to 8.5 mg/L), assuming unquantifiable serum concentrations to be 50% of the lower limit of quantification. Median infant blood levels were 28.9% (range 0.6 to 90.3%) of their mothers’ blood levels.[26]

One hundred twenty-nine infants whose mothers were taking lamotrigine monotherapy during pregnancy and postpartum had measurements of lamotrigine in serum taken between days 2 and 5 (median 3 days) postpartum, usually before the morning maternal dose, for routine monitoring. Their average serum concentration was 1.9 mg/L. Lamotrigine serum levels averaged 1 mg/L in the infants of four women taking a concomitant enzyme inducer and 5.5 mg/L in the infants of ten mothers taking concomitant valproic acid.[17]

Five prospectively followed breastfed infants whose mothers were taking lamotrigine in dosages of 50 to 400 mg daily had serum lamotrigine concentrations measured 3 to 7 times (average 5.2 times) during the first 6 months of life. Except for an infant whose mother was taking 50 mg daily, all infants had serum concentrations in the therapeutic range in adults (range 1.2 to 2.9 mg/L; mean 2.2 mg/L) after 1 month of age. Two infants had at least one plasma level in the adult therapeutic range for epilepsy, 2.8 and 2.9 mg/L. Infant serum concentrations decreased in each case after switching to mixed feeding or maternal dosage reduction.[27]

Follow-up data was compiled at two Swedish medical centers over an 11-year period from 46 breastfed infants whose mothers were taking lamotrigine. Two-thirds of the infants were exclusively breastfed from birth to over 2 months of age. Mean infant lamotrigine serum concentration was 4.98 micromoles/L (1.3 mg/L) and the mean infant to mother serum concentration ratio was 0.27. Lamotrigine concentrations within the reference range for epilepsy treatment were detected in six infants. Infant lamotrigine concentrations were slightly higher in the first month of life with lower concentrations thereafter. Around a fifth of the exposed infants reached a therapeutic serum level of lamotrigine. Infants whose mothers were taking 150 mg daily or less had no measurable lamotrigine serum concentrations.[28]

Five infants aged 1 to 3.3 months were breastfed by mothers taking lamotrigine in daily dosages of 150 to 300 mg. The mean measured plasma concentration was 1.3 mg/L (range 0.5 to 2.2 mg/L) at 0.8 to 5.5 hours after the last feeding.[18]

### Effects in Breastfed Infants

One infant was exclusively breastfed from day 2 of life during maternal lamotrigine 300 mg daily, which was decreased at 6 weeks postpartum to 200 mg daily and 50% formula was introduced. Examinations every 4 weeks showed normal development and no evidence of intellectual disabilities or neurologic deficits. An electroencephalogram at 4 weeks of age showed no signs of pathology.[3]

A breastfed infant whose mother was taking lamotrigine 300 mg daily during pregnancy and postpartum had no observable adverse effects up to 5 months of age.[4]

The same authors reported 9 previously unreported infants who were breastfed during maternal lamotrigine therapy (dosage range 100 to 800 mg daily) with no adverse effects.[6,7]

Thirty-five pregnancies in 34 mothers who were taking lamotrigine during pregnancy were monitored. An unstated fraction of them breastfed their infants. No adverse effects in infants were observed.[5]

An exclusively breastfed infant whose mother was taking lamotrigine 200 mg and levetiracetam 2.5 g daily during pregnancy and lactation appeared healthy to the investigators throughout the 6- to 8-week study period.[29]

The breastfed infant of a woman taking lamotrigine 300 mg daily developed normally during the first 4 months of life and no adverse effects were observed.[30]

A 6-week-old infant developed apparent withdrawal symptoms after abrupt weaning by a mother who was taking lamotrigine 200 mg daily during late pregnancy and postpartum. Symptoms included loss of appetite, neuromotor hyperexcitability and irritability. Symptoms occurred 2 weeks after weaning and were completely alleviated within 48 hours after instituting lamotrigine 1 mg/kg daily in the infant. Neuromotor development of the infant normalized 1 month after discontinuing therapy.[31] The reaction is rated as probably caused by lamotrigine in breastmilk.

The Berlin Teratogen Information Service evaluated 61 infants exposed to lamotrigine in breastmilk (46 prospectively and 15 retrospectively). The mean maternal lamotrigine dosage was 304 mg/day (range 25 to 1150 mg/day), the mean follow up time after birth was 11.5 weeks (range 1 to 44 weeks). Twelve infants had symptoms not related to prematurity, including feeding problems, persistent crying, gastrointestinal symptoms, icterus prolongatus and irritability. In the prospective group, symptoms occurred in 7 infants (15.2%). Liver enzymes were measured in 15 babies. Three infants had elevated SGOT 112–143 units/L and SGPT 112–181 units/L (age 13, 14 and 14 weeks, lamotrigine serum levels 2.3 to 6.6 mg/L). In two of the three cases liver enzymes normalized after discontinuation of breast feeding. There was no enzyme control in the third child.[21]

Six infants with a median age of 4.1 months (range 0.1 to 5.1 months) were breastfed during maternal use of lamotrigine in an average dosage of 6.3 mg/kg daily. Five were exclusively breastfed and one was about 50% breastfed. Neither the mothers nor the attending pediatricians noted adverse effects. A clinical pediatric assessment in 3 of the infants also revealed no adverse effects.[8]

Thirty infants whose mothers were taking lamotrigine were followed during breastfeeding. None of the infants developed a rash. Among infants who were monitored by laboratory testing, no abnormalities in liver tests, electrolytes (n = 10) or hematocrits (n = 8) were noted. Elevated platelet counts were observed in 7 of 8 infants tested (average age 3.8 weeks, range 2 to 10 weeks), with no adverse clinical effects.[10]

A mother was taking 875 mg of lamotrigine daily at term and her dosage was slowly reduced by 25 mg daily at weekly intervals beginning 2 weeks postpartum. Her infant was fully breastfed and on day 16 postpartum while she was taking 850 mg daily, the infant experienced a severe apneic episode requiring cardiac compressions to maintain perfusion and was responsive only to painful stimuli. The infant's mother was taking a high dosage and had extensive drug excretion into breastmilk, and the infant's serum concentration was at the high end of the therapeutic range for children, but the fact that no adverse effects had occurred prior to day 16 could not be explained. Lamotrigine was assessed to be the probable causes of the apneic episode.[12]

Three women with bipolar disorder breastfed their infants during pregnancy and breastfeeding. One took 50 mg daily at term and increased her dose to 200 mg within one month. She breastfed her infant exclusively for 12 months. An unrelated infant rash occurred at 4 months of age, but the infant's growth and development were normal at 18 months of age. Another woman took lamotrigine 250 mg daily while she breastfed (extent not stated) her infant for several weeks. The infant's growth and development were normal at 18 months of age. The third mother also took 250 mg daily while breastfeeding (extent not stated) for at least 15 months. At 4 months of age, the infant developed a rash on the neck that resolved spontaneously; the infant's growth and development were normal at 15 months of age.[32]

Five breastfed preterm infants were reported whose mothers were taking lamotrigine. Transient elevation of liver enzymes occurred in twins whose mother was taking other unspecified medications for bipolar disorder. No adverse effects were seen in the other infants.[23]

A prospective cohort study in Norway followed infants of mothers who took antiepileptic drugs during pregnancy and lactation and compared to infants with mothers with untreated epilepsy and infants with fathers who took antiepileptics as control groups. Of the 223 mothers studied, 71 were taking lamotrigine monotherapy. Infants were assessed at 6, 18 and 36 months of age. Continuous breastfeeding in children of women using antiepileptic drugs was associated with no greater impaired development than those with no breastfeeding or breastfeeding for less than 6 months.[33,34]

All adverse reactions in breastfed infants reported in France between January 1985 and June 2011 were compiled by a French pharmacovigilance center. Of 174 reports, lamotrigine was reported to cause adverse reactions in 6 infants and to be one of the drugs most often suspected in serious adverse reactions, such as sedation, hypotonia, weight loss and liver damage.[35]

In a case series of 6 women who took lamotrigine throughout pregnancy and postpartum in dosages between 200 and 400 mg daily, 4 of them breastfed their infants. One breastfed for only 2 days, 1 was exclusively breastfeeding at 3 weeks postpartum, and 2 were feeding both breastmilk and formula at 8 to 13 weeks postpartum. None of the infants appeared to be adversely affected.[36]

A woman with bipolar disorder took lamotrigine 100 mg and quetiapine 25 mg daily for the treatment of bipolar disorder during two pregnancies. After the first birth, she did not breastfeed, but she breastfed (extent not stated) the second infant. At the 2-month well baby checkup, the infant was meeting all developmental milestones.[37]

Two women received lamotrigine for postpartum bipolar II postpartum depression. One took 50 mg daily and the other took a combination of 300 mg of lamotrigine and 300 mg of quetiapine daily while breastfeeding (extent not stated). The authors reported no major adverse reactions in their breastfed infants.[38]

A 12-day-old exclusively breastfed male infant presented with severe weight loss and hypernatremic dehydration because of inadequate milk intake and a 30% weight loss since birth. The infant's mother was being treated for bipolar disorder with lamotrigine 250 mg orally once daily, aripiprazole 15 mg orally once daily, and sertraline 100 mg orally once daily. She was also taking levothyroxine 50 mcg once daily, a prenatal multivitamin, and folic acid. On initial evaluation in the emergency department, he was pale, with marbled skin, dry mucous membranes, decreased skin turgor, and bluish feet with prolonged capillary refill. The right foot eventually became darker with blackened toes, and he developed gangrene of the right lower limb, which did not respond to medical therapy and required amputation of all five toes and surgical debridement of the metatarsals. Necrosis was attributed to arterial microthrombi caused by disseminated intravascular coagulation after severe dehydration. The authors considered the mother's medications as a possible cause of the dehydration and related problems.[39]

A woman was taking lamotrigine during pregnancy and postpartum for epilepsy. Her 40-day-old full-term breastfed infant was admitted to the hospital for crying and refusal of food. Laboratory examination revealed anemia, thought to be caused by lamotrigine. The infant's serum lamotrigine concentration was 1.4 mg/L. Breastfeeding was reduced, but after 10 days, anemia had not improved, and an asymptomatic neutropenia was found. Breastfeeding was discontinued and the blood tests normalized over the next 2 weeks. The reaction was possibly caused by lamotrigine in breastmilk.[25]

A retrospective study in Japan compared the outcome of 20 full-term, mostly exclusively infants breastfed by mothers taking lamotrigine in an average dosage of 161 mg daily (range: 50–400 mg daily) to a comparable control group of mothers. Infants were followed until 1 moth of age at which time the exclusive breastfeeding rate was 55%. Five of the women taking lamotrigine were also taking other psychotropic drugs which were phenytoin and phenobarbital in one mother, with the others unspecified. Although some adverse effect were reported, drowsiness (n = 3), skin rash (n = 11), jaundice (n = 8), heart murmur (n = 1), poor suckling (n = 1), and retractive breathing (n = 1), the frequency was no greater than in the control group at one-month of age.[40]

In a study of 17 nursing mothers who were taking lamotrigine therapeutically in doses ranging from 1.6 to 7.6 mg/kg daily, 13 infants were exclusively breastfed 4 were between 50% and 75% breastfed. The mothers reported no adverse effects in their breastfed infants during the study and none of the mothers reported developmental problems in their infants in follow-up telephone calls when the infants reached 12 to 24 months of age.[16]

A retrospective study of 102 women with epilepsy found that women taking lamotrigine were less likely to initiate and continue breastfeeding at 3 months postpartum than women taking levetiracetam.[41]

In a multicenter study of women in the United Kingdom exposed to anticonvulsants during pregnancy and breastfeeding, 84 women who were exposed to anticonvulsants breastfed their infants were compared to 81 women not exposed to antiseizure medications. Of the women taking anticonvulsants, 33% were taking lamotrigine alone. No negative effect of breastfeeding was observed in cognitive, language or motor development in the breastfed infants at 1 and 2 years, although only 29% of women breastfed longer than 3 months.[42]

One breastfed infant whose mother was taking lamotrigine reportedly developed transient neutropenia and increased transaminases, but other possible causes were not ruled out.[27]

A retrospective study of 46 infants was done in 2 Swedish hospitals on infants who breastfed during maternal lamotrigine use. At the follow up, eight (17%) infants presented with clinical symptoms that were potentially connected to the lamotrigine exposure. Liver transaminases were elevated in three infants. Five had inadequate growth, two had feeding problems and one was found to be hypotonic and tired at 43 days of age and needed hospitalization. The infant had a plasma lamotrigine in the therapeutic range that investigators to be the most likely cause of the symptoms. Symptoms were resolved after discontinuing breastfeeding. The study found that infants of mothers taking 150 mg daily or less had undetectable plasma concentrations and no reported adverse effects. They felt that in this maternal dosage range, breastfed infants could undergo less intensive monitoring.[28]

A review of 10 years of reports to the European adverse drug reaction database EudraVigilance found 6 unspecified serious adverse reactions reported in breastfed infants associated with lamotrigine. Further details of the cases were not reported.[43]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Seizure Disorder) Carbamazepine, Divalproex, Gabapentin, Oxcarbazepine, Phenytoin, Valproic Acid

### References

1 Meador KJ, Baker GA, Browning N, et al. Breastfeeding in children of women taking antiepileptic drugs: Cognitive outcomes at age 6 years. JAMA Pediatr 2014;168:729–36.24934501
2 Liu Z, Li Y, Chen Y, et al. Physiologically based pharmacokinetic integrated models for lamotrigine to evaluate drug exposure and optimize dosage during pregnancy, foetal period, postpartum period, and in breastfed neonates. Br J Clin Pharmacol 2026;92:922–34.41183527
3 Rambeck B, Kurlemann G, Stodieck SRG, et al. Concentrations of lamotrigine in a mother on lamotrigine treatment and her newborn child. Eur J Clin Pharmacol 1997;51:481–4.9112063
4 Tomson T, Öhman I, Vitols S. Lamotrigine in pregnancy and lactation: A case report. Epilepsia 1997;38:1039–41.9579945
5 Berry DJ. The disposition of lamotrigine throughout pregnancy. Ther Drug Monit 1999;21:450. https://journals.lww.com/drug-monitoring/citation/1999/08000/the_disposition_of_lamotrigine_throughout.98.aspx
6 Öhman I, Tomson T, Vitols S. Lamotrigine (LTG) pharmacokinetics during delivery and lactation. Ther Drug Monit 1999;21:478.
7 Öhman I, Vitols S, Tomson T. Lamotrigine in pregnancy: Pharmacokinetics during delivery, in the neonate, and during lactation. Epilepsia 2000;41:709–13.10840403
8 Page-Sharp M, Kristensen JH, Hackett LP, et al. Transfer of lamotrigine into breast milk. Ann Pharmacother 2006;40:1470–1.16868219
9 Ivana K, Milan G, Blanka K, et al. Therapeutic monitoring of lamotrigine during delivery, in the neonatal period, and during lactation. Ther Drug Monit 2007;29:477. doi:10.1097/FTD.0b013e31813797e8
10 Newport DJ, Pennell PB, Calamaras MR, et al. Lamotrigine in breast milk and nursing infants: Determination of exposure. Pediatrics 2008;122:e223–31.18591203
11 Fotopoulou C, Kretz R, Bauer S, et al. Prospectively assessed changes in lamotrigine-concentration in women with epilepsy during pregnancy, lactation and the neonatal period. Epilepsy Res 2009;85:60–4.19272754
12 Nordmo E, Aronsen L, Wasland K, et al. Severe apnea in an infant exposed to lamotrigine in breast milk. Ann Pharmacother 2009;43:1893–7.19826099
13 Paulzen M, Stingl JC, Augustin M, et al. Comprehensive measurements of intrauterine and postnatal exposure to lamotrigine. Clin Pharmacokinet 2019;58:535–43.30255309
14 Kacirova I, Grundmann M, Brozmanova H. A short communication: Lamotrigine levels in milk, mothers and breast-fed infants during the 1st postnatal month. Ther Drug Monit 2019;41:401–4.30688868
15 Khosrowshahi EM, Jouyban A, Farajzadeh MA, et al. pH-induced homogeneous liquid-liquid microextraction method based on new switchable deep eutectic solvent for the extraction of three antiepileptic drugs from breast milk. Bioanalysis 2021;13:1087–99.34275330
16 Kohn E, Dinavitser N, Berlin M, et al. Magnitude of lamotrigine exposure through breastfeeding. Breastfeed Med 2022;17:341–8.35049332
17 Kacirova I, Grundmann M, Brozmanova H. Monitoring of lamotrigine concentrations in mothers, colostrum, and breastfed newborns during the early postpartum period. Biomed Pharmacother 2022;151:113167.35617804
18 den Besten-Bertholee D, Wegner I, Touw DJ, et al. Lamotrigine use in lactating women: Passage into breast milk and infant exposure: Grand round/a case study. Ther Drug Monit 2025;47:317–9.39688255
19 de Haan GJ, Edelbroek P, Segers J, et al. Gestation-induced changes in lamotrigine pharmacokinetics: A monotherapy study. Neurology 2004;63:571–3.15304599
20 Liporace J, Kao A, D'Abreu A. Concerns regarding lamotrigine and breast-feeding. Epilepsy Behav 2004;5:102–5.14751214
21 Padberg S, Weber-Schoendorfer C, Schaefer C. Lamotrigine during lactation. Reprod Toxicol 2008;26:70–1. doi:10.1016/j.reprotox.2008.05.038
22 Cibert M, Gouraud A, Vial T, et al. A physiologically-based pharmacokinetic model to predict neonate exposure to drugs during breast-feeding: Application to lamotrigine. Fundam Clin Pharmacol 2010;24 (Suppl. 1):51. doi:10.1111/j.1472-8206.2010.00819.x
23 Precourt A, Morin C. Use of lamotrigine during breastfeeding: Descriptive analysis of our population and report of five cases of premature neonates. Breastfeed Med 2011;6 (Suppl 1):S–18. doi:10.1089/bfm.2011.9985
24 Clark CT, Klein AM, Perel JM, et al. Lamotrigine dosing for pregnant patients with bipolar disorder. Am J Psychiatry 2013;170:1240–7.24185239
25 Bedussi F, Relli V, Faraoni L, et al. Normocytic normochromic anaemia and asymptomatic neutropenia in a 40-day-old infant breastfed by an epileptic mother treated with lamotrigine: Infant's adverse drug reaction. J Paediatr Child Health 2018;54:104–5.29314386
26 Birnbaum AK, Meador KJ, Karanam A, et al. Antiepileptic drug exposure in infants of breastfeeding mothers with epilepsy. JAMA Neurol 2020;77:441–50.31886825
27 Le Souder C, Harrewijn I, Mathieu O, et al. Monitoring of lamotrigine concentrations in five breastfed newborns. Fundam Clin Pharmacol 2023;37:163–4. doi:10.1111/fcp.12908 36082507
28 Alvarez I, Tötterman K, Honkaniemi E, et al. Breastfed infants exposed to lamotrigine faced a low risk of toxic effects. Acta Paediatr 2025;114:346–54.39300873
29 Johannessen SI, Helde G, Brodtkorb E. Levetiracetam concentrations in serum and in breast milk at birth and during lactation. Epilepsia 2005;46:775–7.15857447
30 Gentile S. Lamotrigine in pregnancy and lactation. Arch Womens Ment Health 2005;8:57–8.15868389
31 Popescu L, Marceanu M, Moleavin I. Withdrawal of lamotrigine caused by sudden weaning of a newborn: A case report. Epilepsia 2005;46 (Suppl. 6):407. doi:10.1111/j.1528-1167.2005.460602.x
32 Wakil L, Epperson CN, González J, et al. Neonatal outcomes with the use of lamotrigine for bipolar disorder in pregnancy and breastfeeding: a case series and review of the literature. Psychopharmacol Bull 2009;42:91–8.19752842
33 Veiby G, Engelsen BA, Gilhus NE. Early child development and exposure to antiepileptic drugs prenatally and through breastfeeding: A prospective cohort study on children of women with epilepsy. JAMA Neurol 2013;70:1367–74.24061295
34 Vajda F. Epilepsy: Effects of exposure to antiepileptic drugs during development. Nat Rev Neurol 2014;10:11–2.24323050
35 Soussan C, Gouraud A, Portolan G, et al. Drug-induced adverse reactions via breastfeeding: A descriptive study in the French Pharmacovigilance Database. Eur J Clin Pharmacol 2014;70:1361–6.25183382
36 Prakash C, Hatters-Friedman S, Moller-Olsen C, et al. Maternal and fetal outcomes after lamotrigine use in pregnancy: A retrospective analysis from an urban maternal mental health centre in New Zealand. Psychopharmacol Bull 2016;46:63–9.27738382
37 Lévesque S, Riley C. Fetal exposure to lamotrigine and quetiapine in two consecutive pregnancies. Arch Womens Ment Health 2017;20:237–9.27785634
38 Sharma V, Sommerdyk C. Lamotrigine in the prevention of bipolar II postpartum depression. Prim Care Companion CNS Disord 2016;18 27907274
39 Morin C, Chevalier I. Severe hypernatremic dehydration and lower limb gangrene in an infant exposed to lamotrigine, aripiprazole, and sertraline in breast milk. Breastfeed Med 2017;12:377–80.28481632
40 Yashima K, Obara T, Matsuzaki F, et al. Evaluation of the safety of taking lamotrigine during lactation period. Breastfeed Med 2021;16:432–8.33819427
41 Al-Faraj AO, Pandey S, Herlihy MM, et al. Factors affecting breastfeeding in women with epilepsy. Epilepsia 2021;62:2171–9.34289107
42 Bromley RL, Bullen P, Campbell E, et al. Neurodevelopment of babies born to mothers with epilepsy: A prospective observational cohort study. Epilepsia 2023;64:2454–71.37403560
43 Heerfordt IM, Gotfredsen DR, Horwitz H, et al. EudraVigilance insights: Suspected adverse drug reactions in infants through breastfeeding. Br J Clin Pharmacol 2025;91:2431–6.40190021

## Substance Identification

### Substance Name

Lamotrigine

### CAS Registry Number

84057-84-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticonvulsants

Antimanic Agents

Antidepressive Agents